# Tivozanib

CASRN: 475108-18-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of tivozanib during breastfeeding. Because tivozanib is >99% bound to plasma proteins, the amount in milk is likely to be low. However, because of its potential toxicity in the breastfed infant and its half-life of 111 hours, the manufacturer recommends that breastfeeding be discontinued during tivozanib therapy and for 1 month after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Tivozanib

### CAS Registry Number

475108-18-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Enzyme Inhibitors

Protein Kinase Inhibitors

Tyrosine Kinase Inhibitors